# Dobutamine

CASRN: 34368-04-2

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of dobutamine during breastfeeding. Because of its poor oral bioavailability and short half-life, any dobutamine in milk is unlikely to affect the infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information in nursing mothers was not found as of the revision date. Unlike dopamine, dobutamine infusion does not affect serum prolactin concentration in infants and in adult males.[1,2] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### References

1 Filippi L, Pezzati M, Poggi C, et al. (2007). Dopamine versus dobutamine in very low birthweight infants: Endocrine effects. Arch Dis Child Fetal Neonatal Ed.
2 Schilling T, Grundling M, Strang CM, et al. (2004). Effects of dopexamine, dobutamine or dopamine on prolactin and thyreotropin serum concentrations in high-risk surgical patients. Intensive Care Med.

## Substance Identification

### Substance Name

Dobutamine

### CAS Registry Number

34368-04-2

### Drug Class

Breast Feeding

Lactation

Adrenergic beta-Agonists

Cardiotonic Agents

Catecholamines

Sympathomimetics